# Avapritinib

CASRN: 1703793-34-3

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of avapritinib during breastfeeding. Because avapritinib is 98.8% bound to plasma proteins, the amounts in milk are likely to be low. However, the manufacturer recommends avoiding breastfeeding during therapy and for 2 weeks following the final dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Avapritinib

### CAS Registry Number

1703793-34-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antineoplastic Agents

Enzyme Inhibitors

Protein Kinase Inhibitors

Signal Transduction Inhibitors

Tyrosine Kinase Inhibitors